# Paritaprevir

CASRN: 1216941-48-8

## Drug Levels and Effects

### Summary of Use during Lactation

Paritaprevir has not been studied in nursing mothers being treated for hepatitis C infection. Because it is greater than 97% bound to maternal plasma proteins, amounts in breastmilk are likely to be very low.

Ritonavir used as a booster has been studied in several studies of breastfeeding mothers. It is excreted into milk in measurable concentrations and low levels can be found in the blood of some breastfed infants. No reports of adverse reactions in breastfed infants have been reported. For more information, refer to the LactMed record on ritonavir.

Hepatitis C is not transmitted through breastmilk and breastmilk has been shown to inactivate hepatitis C virus (HCV).[1–4] However, the Centers for Disease Control recommends that mothers with HCV infection should consider abstaining from breastfeeding if their nipples are cracked or bleeding. It is not clear if this warning would apply to mothers who are being treated for hepatitis C.

Infants born to mothers with HCV infection should be tested for HCV infection; because maternal antibody is present for the first 18 months of life and before the infant mounts an immunologic response, nucleic acid testing is recommended.[1,4]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Hepatitis C) Interferon Alfa, Interferon Alfacon-1, Peginterferon Alfa, Sofosbuvir

### References

1 Cottrell EB, Chou R, Wasson N, . Reducing risk for mother-to-infant transmission of hepatitis C virus: A systematic review for the U.S. Preventive Services Task Force. Ann Intern Med 2013;158:109–13.23437438
2 Pfaender S, Heyden J, Friesland M, . Inactivation of hepatitis C virus infectivity by human breast milk. J Infect Dis 2013;208:1943–52.24068703
3 Tovo PA, Calitri C, Scolfaro C, . Vertically acquired hepatitis C virus infection: Correlates of transmission and disease progression. World J Gastroenterol 2016;22:1382–92.26819507
4 Workowski KA, Bachmann LH, Chan PA, . Sexually transmitted infections treatment guidelines, 2021. MMWR Recomm Rep 2021;70:1–187.

## Substance Identification

### Substance Name

Paritaprevir

### CAS Registry Number

1216941-48-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antiviral Agents

Protease Inhibitors